# Chondroitin

CASRN: 9007-27-6

## Drug Levels and Effects

### Summary of Use during Lactation

Chondroitin sulfate consists of a mixture of large glycosaminoglycans and disaccharide polymers, usually derived from shark or bovine cartilage. It is most commonly used to treat osteoarthritis. Chondroitin sulfate has no specific lactation-related uses. Chondroitin sulfate is poorly absorbed orally with a bioavailability of about 10%. It is well tolerated with occasional gastrointestinal upset reported. Although no studies exist on the use of chondroitin sulfate supplements during breastfeeding, small amounts occur naturally in breastmilk where it might have an inhibitory effect on microbial binding to cellular receptors in the infant or, helping prevent infections, or acting as an antioxidant to protect the infant from oxidative stress. Mothers of preterm infants excrete greater amounts of chondroitin into breastmilk than mothers of fullterm infants.[1,2] The use of chondroitin by a nursing mother is unlikely to adversely affect the breastfed infant.

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Pooled human milk from healthy subjects was found to have an average chondroitin sulfate concentration of 231 mg/L, representing 55.5% of all human milk glycosaminoglycans.[1]

A lactating woman with unilateral breast cancer had the breastmilk chondroitin sulfate content analyzed from each breast. Milk from the unaffected breast had chondroitin sulfate content similar to previous studies. Milk from the cancerous breast had a large increase in the chondroitin sulfate disaccharide sulfated in position 6 of N-acetylgalactosamine.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Coppa GV, Gabrielli O, Buzzega D, et al. (2011). Composition and structure elucidation of human milk glycosaminoglycans. Glycobiology.
2 Coppa GV, Gabrielli O, Zampini L, et al. (2012). Glycosaminoglycan content in term and preterm milk during the first month of lactation. Neonatology.
3 Mannello F, Maccari F, Santinelli A, et al. (2011). Chondroitin sulfate structure is modified in human milk produced by breast affected by invasive carcinoma. Breast.

## Substance Identification

### Substance Name

Chondroitin

### CAS Registry Number

9007-27-6

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Glycosaminoglycans